# Flurbiprofen

CASRN: 5104-49-4

## Drug Levels and Effects

### Summary of Use during Lactation

Because of the low levels of flurbiprofen in breastmilk and its short half-life it is unlikely to adversely affect the breastfed infant, especially if the infant is older than 2 months.

Maternal use of flurbiprofen eye drops would not be expected to cause any adverse effects in breastfed infants. To substantially diminish the amount of drug that reaches the breastmilk after using eye drops, place pressure over the tear duct by the corner of the eye for 1 minute or more, then remove the excess solution with an absorbent tissue.

### Drug Levels

Maternal Levels. Ten women who were at least 1 month postpartum were given a single 100 mg tablet of flurbiprofen. Flurbiprofen was undetectable (<70 mcg/L) in the milk of 5 of the women. In the remaining 5 women, an average peak milk level of 92 mcg/L occurred at about 3 hours after the dose. Flurbiprofen was undetectable in any mother's milk by 24 hours after the dose.[1] Using data from this study, a fully breastfed infant would ingest an estimated maximum daily dosage of 2.2 mcg/kg after this maternal dosage or about 0.1% of the maternal weight-adjusted dosage.

Twelve women who were 3 to 5 days postpartum received flurbiprofen 50 mg orally four times a day for 9 doses over 3 days. Milk samples were collected at various unspecified times during this regimen. Flurbiprofen was undetectable (<50 mcg/L) in all but 3 milk samples. One woman had levels of 70 mcg/L one hour after her first dose and 60 mcg/L just before her second dose. Another mother had a milk flurbiprofen concentration of 80 mcg/L two hours after her last dose. The authors estimated that the maximum dose that a completely breastfed infant would ingest is less than 0.5% of the maternal weight-adjusted dosage.[2]

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

A retrospective medical record review in Taiwan compared the full-term breastfed infants of women who received acetaminophen (n = 348) to those who received flurbiprofen (n = 132) for postpartum analgesia after a vaginal birth. There was no statistically significant difference in the percentage of infants with hyperbilirubinemia between those whose mothers received flurbiprofen (0.76%) and those whose mothers received acetaminophen(2.01%).[3]

A study of full-term, vaginally delivered breastfed neonates compared those whose mothers received acetaminophen (n = 348) to those whose mothers received flurbiprofen (n = 132) for postpartum pain. Seven (2%) newborns of acetaminophen users had hyperbilirubinemia and 1 (0.76%) newborn of the flurbiprofen users had hyperbilirubinemia. The differences was not statistically significant.[3]

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

(Systemic) Acetaminophen, Celecoxib, Diclofenac, Ibuprofen, Indomethacin, Naproxen, Piroxicam

### References

1 Cox SR, Forbes KK. Excretion of flurbiprofen into breast milk. Pharmacotherapy 1987;7:211-5.3444752
2 Smith IJ, Hinson JL, Johnson VA, et al. Flurbiprofen in post-partum women: Plasma and breast milk disposition. J Clin Pharmacol 1989;29:174-84.2715375
3 Fu SC, Wang CY, Lin CK. Do postpartum nonsteroidal antiinflammatory drugs (NSAIDs) affect neonatal hyperbilirubinaemia? Taiwan J Obstet Gynecol 2020;59:891-4.33218407

## Substance Identification

### Substance Name

Flurbiprofen

### CAS Registry Number

5104-49-4

### Drug Class

Breast Feeding

Lactation

Milk, Human

Analgesic Agents

Anti-inflammatory Agents, Nonsteroidal